# Drotaverine

CASRN: 14009-24-6

## Drug Levels and Effects

### Summary of Use during Lactation

Drotaverine is not marketed in the United States, but is available in other countries. Drotaverine has been used for treating milk stasis, but no scientific studies are available on drotaverine and breastfeeding. If a mother requires drotaverine, it is not a reason to discontinue breastfeeding. Until more data become available, drotaverine should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A retrospective study of 42 nursing mothers who were having milk stasis found that 23 of them were taking drotaverine. After medical intervention, 41 of them were able to continue lactation. It is unclear if drotaverine was a cause of milk stasis or an “innocent bystander” in the condition.[1]

### References

1 Gerashchenko J. Rendering assistance to women with lactation disorders when ensuring natural breastfeeding. Breastfeed Med 2019;14:S–8. doi:10.1089/bfm.2019.29135.abstracts

## Substance Identification

### Substance Name

Drotaverine

### CAS Registry Number

14009-24-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics

Parasympatholytics

Vasodilator Agents